# Cefditoren

CASRN: 104145-95-1

## Drug Levels and Effects

### Summary of Use during Lactation

Cefditoren is no longer marketed in the United States. Because of the low levels of cefditoren in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush, have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefditoren is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Twelve lactating women were given cefditoren 200 mg before a meal. Complete milk samples were collected with a breast pump 1 hour before administration and at 1, 2, 3, 4, 6, 8, and 12 hours after the dose. The average peak milk level was 11.3 mcg/L, at an average of 4.87 hours after the dose and the half-life in milk was 2.42 hours. The average milk concentration was 5.65 mcg/L, which resulted in a relative infant dose (RID) of 0.0073% of the weight-adjusted dosage.[1] However, the actual milk volumes were low at an average of 405 mL/day and the infant weights averaged 8.8 kg, resulting in a daily infant milk intake of only 45 mL/kg. Using the standard daily milk volume of 150 mL/kg, the RID would be 0.025%. Furthermore, the trough concentration at 12 hours after the dose averaged 5.94 mcg/L, which is similar to the average milk level. Therefore, the peak and average milk levels and the RID are likely to be about double these values at steady-state, but still low (RID~0.05%).

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ceftibuten

### References

1 Chen Z, Feng S, Cai L, et al. Pharmacokinetic study of cefditoren pivoxil in breast milk and blood of lactating women. Biopharm Drug Dispos 2025;46:147–54.40794466

## Substance Identification

### Substance Name

Cefditoren

### CAS Registry Number

104145-95-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins